# Clonazepam

CASRN: 1622-61-3

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal clonazepam occasionally causes sedation in their breastfed infants, especially when given with other central nervous system depressants. A safety scoring system finds clonazepam possible to use cautiously during breastfeeding,[1] and an expert consensus guideline indicates that low-dose clonazepam is an acceptable choice for refractory restless leg syndrome during lactation.[2] Monitor the infant for drowsiness, adequate weight gain, and developmental milestones, especially in younger, exclusively breastfed infants and when using combinations of psychotropic drugs. Monitoring of the infant's serum concentration may be indicated if excessive sedation occurs. Because it has a long half-life, a safer, shorter-acting drug is preferred over clonazepam, if possible.[3,4]

### Drug Levels

In published reports of anticonvulsant use during breastfeeding, most women were taking a combination of anticonvulsants. Some other anticonvulsants (e.g., phenytoin, carbamazepine) stimulate the metabolism of other drugs including anticonvulsants, whereas others (e.g., valproic acid) inhibit the metabolism of other drugs. Therefore, the relationship of the maternal dosage to the concentration in breastmilk can be quite variable, making calculation of the weight-adjusted percentage of maternal dosage less meaningful than for other drugs in this database.

Maternal Levels. A breastfed newborn infant whose mother was taking clonazepam during pregnancy and lactation (dosage not stated) had serum levels that increased from about 23 mcg/L at 24 hours of age to 43 mcg/L at 96 hours of age.[5]

Repeated milk clonazepam levels were between 11 and 13 mcg/L in a woman taking clonazepam in an unstated dosage.[6]

A mother taking clonazepam 2 mg twice daily had several milk level measurements on days 2 to 4 postpartum. The highest milk level was 10.7 mcg/L 4 hours after a dose. The authors calculated that an exclusively breastfed infant would receive a maximum of 2.5% of the maternal weight-adjusted dosage of clonazepam.[7]

A mother who was taking clonazepam 6 mg daily and carbamazepine 1400 mg daily had a milk clonazepam level of 12 mcg/L. No details on sampling times were provided.[8]

A woman taking oral clonazepam 1 mg daily donated milk samples between 3 and 6 days postpartum at 2 hours after a dose at the estimated peak serum concentration and just before a dose. The 2-hour level in milk was 6.07 mcg/L. The trough milk level was 4.53 mcg/L.[9]

Infant Levels. One preterm infant had cord blood levels of 19 mcg/L and was not breastfed until 72 hours after delivery. The infant's serum clonazepam level was 2.9 mcg/L at 120 hours after birth, and 1 mcg/L at day 14. The mother's serum level was 32 mcg/L at delivery and repeated milk clonazepam levels were between 11 and 13 mcg/L.[6]

A newborn infant was breastfeeding during a maternal dosage of clonazepam 2 mg twice daily. A pooled sample of infant serum from days 2 to 4 of age contained 4.7 mcg/L of clonazepam.[7]

Ten of 11 breastfed infants whose mothers were taking clonazepam in dosages of 0.25 to 2 mg daily had no detectable (assay limit varied from 5 to 14 mcg/L) clonazepam or metabolites in serum. The infants' average age was 7.9 weeks, but 6 were under 1 month of age. One 1.9 week-old-infant whose mother was taking clonazepam 0.5 mg daily had a serum concentration of 22 mcg/L.[10]

One author reported a mother who was taking clonazepam 6 mg daily and carbamazepine 1400 mg daily. Her breastfed (extent not stated) infant had a serum clonazepam level of 20 mcg/L, while the mother's serum level was 50 mcg/L.[8]

### Effects in Breastfed Infants

Excessive periodic breathing and prolonged apnea and cyanosis occurred in a newborn at 6 hours after birth at 36 weeks gestation and reoccurred repeatedly up to 10 days of age. The neonate was breastfed starting at 72 hours after delivery and her mother took clonazepam (dose not stated) during pregnancy and lactation. The repeated periodic breathing episodes continued up to 10 weeks of age and were possibly related to clonazepam in breastmilk. A neurodevelopmental examination was normal at 5 months of age.[6]

The infant of a mother taking clonazepam 1 mg daily during pregnancy and lactation was rated as highly apathetic and had decreased weight increase and slight neurologic signs at 4 weeks of age, but normal intelligence at 6 years of age.[11]

None of 11 infants whose mothers were taking clonazepam in dosages ranging from 0.25 to 2 mg daily (including 4 who were taking other psychotropic drugs also) had any side effects reported by their mothers. The infants' average age was 7.9 weeks, but 6 were under 1 month of age.[10]

One author reported a mother who was taking clonazepam 6 mg daily and carbamazepine 1400 mg daily. The infant had serum clonazepam levels of about 40% of the mother's serum level. Her infant was described as "somewhat lazy at the breast and tired."[8]

In a telephone follow-up study, 124 mothers who took a benzodiazepine while nursing reported whether their infants had any signs of sedation. Twenty-two mothers took clonazepam while breastfeeding and 1 reported sedation in her infant. She was taking clonazepam 0.25 mg twice daily, flurazepam 15 mg daily, 1 mg of bupropion daily, and 0.75 mg of risperidone daily.[12]

All adverse reactions in breastfed infants reported in France between January 1985 and June 2011 were compiled by a French pharmacovigilance center. Of 174 reports, clonazepam was reported to cause adverse reactions in 5 infants and to be one of the drugs most often suspected in serious adverse reactions, primarily sedation. One two-month old infant had well-documented hypotonia, somnolence and apnea caused by clonazepam in breastmilk.[13]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Anxiety) Lorazepam, Oxazepam, Temazepam (Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118-e26.30601177
2 Picchietti DL, Hensley JG, Bainbridge JL, et al. Consensus clinical practice guidelines for the diagnosis and treatment of restless legs syndrome/Willis-Ekbom disease during pregnancy and lactation. Sleep Med Rev 2015;22:64-77.25553600
3 Davanzo R, Dal Bo, S, Bua J, et al. Antiepileptic drugs and breastfeeding. Ital J Pediatr 2013;39:50.23985170
4 Veiby G, Bjork M, Engelsen BA, et al. Epilepsy and recommendations for breastfeeding. Seizure 2015;28:57-65.25837494
5 Bossi L, Battino D, Caccamo ML, et al. Pharmacokinetics and clinical effects of antiepileptic drugs in newborns of chronically treated epileptic mothers. In: Janz D, Bossi L, Dam M, et al., eds. Epilepsy, pregnancy and the child. New York: Raven Press; 1982:373-81.
6 Fisher JB, Edgren BE, Mammel MC, et al. Neonatal apnea associated with maternal clonazepam therapy: A case report. Obstet Gynecol 1985;66 (3 Suppl):34S-5S.4022513
7 Söderman P, Matheson I. Clonazepam in breast milk. Eur J Pediatr 1988;147:212-3.3366144
8 Schaefer C, Peters P, Miller RK. Drugs during pregnancy and lactation: Treatment options and risk assessment, 3rd ed. Boston: Academic Press; 2015:733. doi:10.1016/C2011-0-09100-7
9 Nishimura A, Furugen A, Umazume T, et al. Benzodiazepine concentrations in the breast milk and plasma of nursing mothers: Estimation of relative infant dose. Breastfeed Med 2021;16:424-31.33449825
10 Birnbaum CS, Cohen LS, Bailey JW, et al. Serum concentrations of antidepressants and benzodiazepines in nursing infants: A case series. Pediatrics 1999;104:e11.10390297
11 Hartmann AM, Koch S, Jager-Roman E, et al. Breast feeding, weight gain and behaviour in newborns of epileptic women. Monatsschr Kinderheilkd 1994;142:505-12.
12 Kelly LE, Poon S, Madadi P, et al. Neonatal benzodiazepines exposure during breastfeeding. J Pediatr 2012;161:448-51.22504099
13 Soussan C, Gouraud A, Portolan G, et al. Drug-induced adverse reactions via breastfeeding: A descriptive study in the French Pharmacovigilance Database. Eur J Clin Pharmacol 2014;70:1361-6.25183382

## Substance Identification

### Substance Name

Clonazepam

### CAS Registry Number

1622-61-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants

Benzodiazepines